# Saxagliptin

CASRN: 945667-22-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of saxagliptin during breastfeeding. Saxagliptin has a shorter half-life than the other dipeptidyl-peptidase IV inhibitors, so it might be a better choice among drugs in this class for nursing mothers. Monitoring of the breastfed infant's blood glucose is advisable during maternal therapy with saxagliptin.[1] However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

### References

1 Berlin CM, Briggs GG. Drugs and chemicals in human milk. Semin Fetal Neonatal Med 2005;10:149-59.15701580

## Substance Identification

### Substance Name

Saxagliptin

### CAS Registry Number

945667-22-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Incretins

Dipeptidyl-Peptidase IV Inhibitors

DPP-4 Inhibitors